# Digoxin

CASRN: 20830-75-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of digoxin in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. If the mother is to receive digoxin intravenously, avoidance of breastfeeding for 2 hours after the dose will lessen the dose the infant receives.

### Drug Levels

Maternal Levels. In 11 women taking digoxin 0.25 mg daily orally, milk digoxin levels obtained on days 3 to 7 postpartum were relatively constant at 0.644 mcg/L.[1] The amounts in milk represent an infant dosage of about 2.3% of the maternal weight-adjusted dosage or 0.097 mcg/kg daily, which is about 1% of the neonatal maintenance dosage.

Milk digoxin levels were 0.41 and 0.78 mcg/L in two mothers taking oral digoxin 0.25 mg daily.[2]

Milk digoxin levels ranged from undetectable (<0.5 mcg/L) to 1 mcg/L in 5 women treated with unspecified doses of digoxin. Milk and serum levels were similar.[3]

A milk digoxin level of 1.9 mcg/L was measured in a mother taking 0.75 mg daily of digoxin during pregnancy and postpartum.[4]

After an intravenous bolus dose of digoxin 0.5 mg in 11 women, digoxin serum and milk levels rapidly equilibrated, with high levels occurring rapidly, dropping to low levels by about 2 hours after the dose. A pharmacokinetic simulation using data from these mothers indicate that a fully breastfed infant would obtain a serum level of only about 3% of a therapeutic level with maternal intake of 0.5 mg daily of digoxin.[5]

Infant Levels. In two breastfed infants whose mothers were taking oral digoxin 0.25 mg daily, digoxin was undetectable (< 0.1 mcg/L) in their serum after 10 days of maternal therapy.[2]

A mother took 0.75 mg daily of digoxin during pregnancy and postpartum. Her infant had a serum level of 0.2 mcg/L after nursing for 7 days, having decreased from a level of 0.6 mcg/L at birth.[4]

### Effects in Breastfed Infants

At least 4 infants have been reported to have been breastfed in studies on digoxin in breastmilk. None had any detectable digoxin effect.[2,4,6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Chan V, Tse TF, Wong V. Transfer of digoxin across the placenta and into breast milk. Br J Obstet Gynaecol 1978;85:605-9.687540
2 Loughnan PM. Digoxin excretion in human breast milk. J Pediatr 1978;92:1019-20.660341
3 Levy M, Granit L, Laufer N. Excretion of drugs in human milk. N Engl J Med 1977;297:789.895815
4 Finley JP, Waxman MB, Wong PY, et al. Digoxin excretion in human milk. J Pediatr 1979;94:339-40.762640
5 Reinhardt D, Richter O, Genz T, et al. Kinetics of the transplacental passage of digoxin from breast feeding mothers to their infants. Eur J Pediatr 1982;138:49-52.7075628
6 Miller MR, Withers R, Bhamra R, et al. Verapamil and breast-feeding. Eur J Clin Pharmacol 1986;30:125-6.3709626

## Substance Identification

### Substance Name

Digoxin

### CAS Registry Number

20830-75-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics

Cardiac Glycosides